# Barium Sulfate

CASRN: 7727-43-7

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because barium sulfate is not absorbed after oral or rectal administration, it will not enter the milk, reach the bloodstream of the infant or cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Barium Sulfate

### CAS Registry Number

7727-43-7

### Drug Class

- Breast Feeding
- Lactation
- Contrast Media
- Barium Compounds